# Flunarizine

CASRN: 52468-60-7

## Drug Levels and Effects

### Summary of Use during Lactation

Flunarizine is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. No information is available on the use of flunarizine during breastfeeding. Because of its long half-life of 19 days in children, expert opinion recommends that flunarizine not be used in migraine prophylaxis in nursing mothers.[1-3] An alternate drug is preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Rimegepant, Topiramate, Valproic Acid

### References

1 Pringsheim T, Davenport WJ, Mackie G, et al. Canadian Headache Society guideline for migraine prophylaxis. Can J Neurol Sci 2012;39:S1-2.22683887
2 Negro A, Delaruelle Z, Ivanova TA, et al. Headache and pregnancy: A systematic review. J Headache Pain 2017;18:106.29052046
3 Davanzo R, Bua J, Paloni G, et al. Breastfeeding and migraine drugs. Eur J Clin Pharmacol 2014;70:1313-24.25217187

## Substance Identification

### Substance Name

Flunarizine

### CAS Registry Number

52468-60-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Calcium Channel Blockers

Histamine H1 Antagonists

Vasodilator Agents